# Amlodipine

CASRN: 88150-42-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that milk levels of amlodipine are usually low and plasma levels in breastfed infants are undetectable. Maternal use of amlodipine during breastfeeding has not caused any adverse effects in breastfed infants. If the mother requires amlodipine, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Thirty-one postpartum women with pregnancy-induced hypertension received amlodipine 5 mg daily by mouth, with the dosage increased as needed to maintain blood pressure of 140/90 mm Hg or less. The final mean dosage for the group was 6 mg (0.099 mg/kg) daily. Simultaneous predose maternal blood and breastmilk samples were obtained within 3 weeks postpartum, after at least 6 days of therapy. The median milk concentration was 11.5 mcg/L (intraquartile range 9.8 to 18 mcg/L). The authors calculated a median infant dosage of 4.2 mcg/kg (intraquartile range 3.1 to 6.3 mcg/kg), which corresponds to a weight-adjusted maternal dosage of 4.2% (intraquartile range 3.1 to 7.3%). However, using the median milk concentration, one would calculate an infant dosage of only 1.73 mcg/kg daily and a weight-adjusted relative dosage of 1.7%. It is unclear why the difference exists between reported and calculate values. In 5 mothers, the weight-adjusted maternal dosage was above 10%, with a maximum value of 15.2% in one mother.[1] All of these calculations are suboptimal because only single points of maternal plasma and milk concentrations were measured rather than using an area-under-the-curve to calculate them.

Six mothers were taking amlodipine 5 mg daily during pregnancy and postpartum. On the second day postpartum, 6 colostrum samples were obtained at 4, 6, 8, 12, 15 and 24 hours following the dose. Amlodipine was undetectable (<0.1 mcg/L) in all samples.[2]

Eight mothers with infants 5 to 7 days old were taking amlodipine 2.5 mg (1 subject) or 5 mg (7 subjects) daily. They donated foremilk samples at various times after the dose. Peak concentrations in milk occurred from 4 to 8 hours after a dose and ranged from 8 to 20 mcg/L in 5 women with more than 4 milk samples. The weight-adjusted maternal dosage averaged 3.3% (range 1.6% to 4.3%) among the 8 mothers.[3]

Infant Levels. A preterm infant of 32 weeks gestation was breastfed exclusively from day 7 to day 20 postpartum. The infant’s mother was taking amlodipine and labetalol in unspecified dosages for hypertension. After 4 days of breastfeeding, the infant’s blood amlodipine level was unmeasurable (lower limit of assay not specified).[4]

Eight infants whose mothers were taking amlodipine 5 mg daily during pregnancy had blood samples taken at 24 to 48 hours postpartum. Amlodipine concentrations were unmeasurable (<0.1 mcg/L) in all samples, although the paper does not state how many of the infants were being breastfed.[2]

Nine infants aged 5 to 7 days were exclusively breastfed by 8 mothers who were taking amlodipine 2.5 mg (1 mother) or 5 mg (7 mothers) daily. Blood samples were taken from the infants before and after nursing at 8 hours after their mothers’ amlodipine dose. All infant blood levels were undetectable (<0.4 mcg/L).[3]

### Effects in Breastfed Infants

A woman took amlodipine for hypertension 5 mg daily beginning 2 weeks postpartum. Her exclusively breastfed infant was examined regularly and at 3 months of age was healthy and had normal physical and neurological development.[5]

One woman received amlodipine 2.5 mg orally twice daily during pregnancy for hypertension associated with glomerulonephritis. The dose was increased to 5 mg twice daily on day 2 postpartum. Her exclusively breastfed infant’s growth was normal throughout the first year of life and no adverse effects were noted.[6]

A preterm infant of 32 weeks gestation was breastfed exclusively from day 7 to day 20 postpartum. The infant’s mother was taking amlodipine and labetalol in unspecified dosages for hypertension. The infant had apnea episodes unrelated to amlodipine. Growth at 2 months of age was slightly low.[4]

Thirty-one women with pregnancy-induced hypertension postpartum received amlodipine 5 mg daily by mouth, with the dosage increased as needed to maintain blood pressure of 140/90 mm Hg or less. Their breastfed (extent not stated) infants exhibited no observed adverse cardiovascular effects within 3 weeks postpartum, although exact measurement methods were not stated.[1]

A telephone survey of 43 women taking postpartum amlodipine for hypertension was conducted. Twenty-three of the women exclusively breastfed and ten mixed-fed while taking the medication. In total, 39 women reported no concerns with neonatal health. Of those with health concerns (infection, asthma, delayed closure patent ductus arteriosus, developmental delay), none of them were related to antenatal amlodipine use. One baby exposed to amlodipine antenatally was admitted to hospital for elective hernia repair at 2 months postpartum.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nifedipine, Nitrendipine

### References

1 Naito T, Kubono N, Deguchi S, . Amlodipine passage into breast milk in lactating women with pregnancy-induced hypertension and its estimation of infant risk for breastfeeding. J Hum Lact 2015;31:301-6.25447596
2 Morgan JL, Kogutt BK, Meek C, . Pharmacokinetics of amlodipine besylate at delivery and during lactation. Pregnancy Hypertens 2018;11:77-80.29523279
3 Aoki H, Ito N, Kaniwa N, . Low levels of amlodipine in breast milk and plasma. Breastfeed Med 2018;13:622-6.30265578
4 Vasa R, Ramírez M. Amlodipine exposure through breastfeeding in a 32 week preterm newborn. Breastfeeding Med 2013;8 (Suppl 1):S-15. doi:10.1089/bfm.2013.9982
5 Ahn HK, Nava-Ocampo AA, Han JY, . Exposure to amlodipine in the first trimester of pregnancy and during breastfeeding. Hypertens Pregnancy 2007;26:179-87.17469008
6 Szucs KA, Axline SE, Rosenman MB. Maternal membranous glomerulonephritis and successful exclusive breastfeeding. Breastfeed Med 2010;5:123-6.20491564
7 Gerretsen H, Nana M, Nelson-Piercy C. Use of amlodipine to treat postpartum hypertension. Obstet Med 2026:1753495x261478144.

## Substance Identification

### Substance Name

Amlodipine

### CAS Registry Number

88150-42-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Calcium Channel Blockers

Vasodilator Agents